# Armodafinil

CASRN: 112111-43-0

## Drug Levels and Effects

### Summary of Use during Lactation

Armodafinil is the R-enantiomer of modafinil. Armodafinil has only been measured in the milk of mothers taking modafinil, where it is the predominant form, and its milk levels were extremely low. Some information from women who breastfed their infant's while using racemic modafinil found no adverse effects in their infants. Until more safety data are available, armodafinil should be used with careful infant monitoring during breastfeeding, or an alternate drug may be preferred.

### Drug Levels

Maternal Levels. A woman with idiopathic hypersomnolence was treated with racemic modafinil 250 mg daily. She was also taking 75 mcg of levothyroxine daily for Hashimoto's thyroiditis, sertraline 200 mg daily for obsessive-compulsive and major depressive disorders, and inhaled albuterol as needed for mild intermittent asthma. At 19 days postpartum, milk samples were collected at 0, 1, 2, 4, 6, 8, 10, 12, and 24 hours after the dose. The trough milk R-modafinil level was 0.43 mg/L, with peak value of 2.3 mg/L at 2 hours after the dose. Based on the average amount of R-modafinil in milk of 1.2 mg/L, the daily infant dosage was estimated to be 0.18 mg/kg. All of these values may be underestimates of the pharmacologically active total drug (both R- and S-enantiomers), because S-modafinil was not measured.[1]

A nursing mother with narcolepsy was taking racemic modafinil 300 mg in the morning and 100 mg at noon. Eight milk samples were collected over a 26-hour period and the active isomer, armodafinil, was measured in milk. The peak milk concentrations of R-modafinil 3.89 and 4.07 mg/L occurred about 2 and 4 hours after the morning dose on the two days, respectively. The lowest milk level was 0.92 mg/L just before the dose on day 2. The authors estimated the R-modafinil infant dosage for a fully breastfed infant to be 294 mcg/kg daily. All of these values may be underestimates of the pharmacologically active total drug (both R- and S-enantiomers), because S-modafinil was not measured.[2-4]

Infant Levels. A nursing mother with narcolepsy was taking modafinil 300 mg in the morning and 100 mg at noon. Her exclusively breastfed infant had a blood sample taken 110 minutes after the morning dose (and 30 minutes after breastfeeding was started), which was 0.19 mg/L, which was 1.6% of the mother’s simultaneous plasma level; however this may be an underestimate of the pharmacologically active total drug (both R- and S-enantiomers) because S-modafinil was not measured.[2,3]

### Effects in Breastfed Infants

In one case-control study of women having narcolepsy with cataplexy, some women (fewer than 6) breastfed their infants while taking modafinil. No adverse effects were noted. The authors felt that the risk from the medication is low.[5]

An infant was exclusively breastfed by a mother taking modafinil 300 mg in the morning and 100 mg at noon. The authors state that the infant had no adverse events during the 2-day study period and normal growth and development at 6 weeks postpartum.[2]

### Effects on Lactation and Breastmilk

A case control study comparing women with narcolepsy with cataplexy to a control group found that those with narcolepsy breastfed longer than those without the disease. The authors felt that the difference likely due to a lower employment rate among the women with narcolepsy.[5]

### Alternate Drugs to Consider

(Narcolepsy) Amphetamine, Dextroamphetamine, Lisdexamfetamine, Methylphenidate, Modafinil, Oxybate Salts, Pitolisant

### References

1 Aurora S, Aurora N, Datta P, et al. Evaluating transfer of modafinil into human milk during lactation: A case report. J Clin Sleep Med 2018;14:2087-9.30518447
2 Leggett C, Ritchie U, Costi L, et al. Infant exposure to armodafinil through human milk following maternal use of modafinil. J Hum Lact 2022;39:218-22.36384330
3 Anderson PO. Armodafinil in milk. J Hum Lact 2023;39:223.37073877
4 Leggett C, Ritchie U, Costi L, et al. Response to Dr. Anderson's letter to the editor: Modafinil and armodafinil in human milk. J Hum Lact 2023;39:224-5.
5 Calvo-Ferrandiz E, Peraita-Adrados R. Narcolepsy with cataplexy and pregnancy: A case-control study. J Sleep Res 2018;27:268-72.28568319

## Substance Identification

### Substance Name

Armodafinil

### CAS Registry Number

112111-43-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Central Nervous System Stimulants

Wakefulness-Promoting Agents